# Vigabatrin

CASRN: 68506-86-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of vigabatrin up to 2000 mg daily produce low levels in milk. Vigabatrin is approved for use in infants in one month and older and amounts in milk are far less than the approved infant dosage. Vigabatrin would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Two nursing mothers were each receiving vigabatrin 1000 mg twice daily. One was also taking slow-release carbamazepine 200 mg twice daily. Milk samples were collected once predose and 3 and 6 hours after the dose at either 6 or 8 days postpartum. In both mothers, the inactive R-isomer was excreted into milk in higher concentrations than the active S-isomer. In the 2 mothers, average concentrations of the R-isomer were 1.7 mg/L in the predose sample, 2.1 mg/L at 3 hours and 3.1 mg/L at 6 hours after the dose. Average concentrations of the S-isomer were 0.4 mg/L in the predose sample, 0.4 mg/L at 3 hours and 0.8 mg/L at 6 hours after the dose. Using peak values, the authors estimated that the maximum dosage that the infant would receive in the mothers would be 2 to 3.6% of the weight-adjusted maternal dosage for the R-isomer and 0.6 to 0.96% of the maternal dosage for the S-isomer.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Tran A, O'Mahoney T, Rey E, et al. (1998). Vigabatrin: Placental transfer in vivo and excretion into breast milk of the enantiomers. Br J Clin Pharmacol.

## Substance Identification

### Substance Name

Vigabatrin

### CAS Registry Number

60643-86-9

### Drug Class

Breast Feeding

Lactation

Anticonvulsants

GABA Agents